# Sulpiride

CASRN: 15676-16-1

## Drug Levels and Effects

### Summary of Use during Lactation

Sulpiride is not approved for marketing in the United States by the U.S. Food and Drug Administration, but is used as a psychotherapeutic agent and galactogogue in other countries. Sulpiride increases serum prolactin, but its clinical value in increasing milk supply is questionable. In a study that enrolled only mothers with documented low milk production a few weeks postpartum, sulpiride was effective in increasing milk volume, but it was only more effective than placebo in avoiding supplementation in those with no initial milk production. Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[1,2] If mothers are provided instruction in good breastfeeding technique and breastfeed frequently, sulpiride is unlikely to provide additional benefit. Whether sulpiride has any benefit as a galactogogue in women who continue to have insufficient milk production after nursing technique and frequency have been optimized has not been studied adequately.

Sulpiride is excreted into breastmilk in rather large amounts, far above the accepted value of 10% of the maternal weight-adjusted dosage in some cases, but blood concentrations in breastfed infants have not been evaluated. Two studies found no adverse effects in breastfed infants whose mothers were treated with sulpiride for 2 to 4 weeks as a galactogogue, although others estimated that the dose in milk was high enough to increase serum prolactin in breastfed infants.[3]

Postpartum mothers are at a relatively high risk for postpartum depression and sulpiride can cause depression as a side effect. Therefore, sulpiride should be avoided in women with a history of major depression and not used for prolonged periods in any mothers during this time of high susceptibility. Tiredness occurred occasionally and cases of headache and leg edema have also been reported in nursing mothers taking sulpiride as a galactogogue.[4,5]

### Drug Levels

Maternal Levels. In a study reported only in abstract form, sulpiride was not detected in milk (study details and assay limit not stated) with maternal dosages of up to 200 mg daily.[6]

Twenty women were taking sulpiride 50 mg twice daily by mouth to enhance milk production. A single milk sample from each woman was taken at 2 hours after the morning dose between the 3rd to the 7th day of therapy. The average milk sulpiride concentration was 970 mcg/L (range 260 to 1970 mcg/L).[7] This translates to an average daily maximum infant dosage of 146 mcg/kg (range 39 to 297 mcg/kg) in the infant or 8.7% (range 2 to 18%) of the weight-adjusted maternal dosage.

Single doses of sulpiride of either 3 mg (n = 5) or 10 mg (n = 4) were given to nursing mothers. After 3 mg, peak milk concentrations ranged from 10 to 37 mcg/L and trough concentrations ranged from 9 to 13 mcg/L. After 10 mg, peak milk concentrations ranged from 37 to 293 mcg/L and trough concentrations ranged from 29 to 85 mcg/L. The authors calculated that a 24-hlur dose to the infant would range from 1.2 to 9.9 mcg after a 3 mg maternal dose and from 3.8 to 46.3 mcg after a 10 mg maternal dose.[3]

A woman with dissociative disorder and persistent dysthymic depression was treated during pregnancy with brotizolam 0.25 mg daily, propericiazine 10 mg daily, and zolpidem 5 mg daily. Zolpidem was discontinued at week 28 and sulpiride 100 mg daily was begun at week 33. Milk samples taken at 7.5 and 11.5 hours after the previous dose on day 9 postpartum contained 445.8 and 192.2 mcg/L of sulpiride, respectively.[8]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

In a study of 14 women given sulpiride 50 mg 3 times daily for 4 weeks, no side effects were reported in their breastfed infants.[5]

In a study of 24 nursing mothers who received sulpiride 50 mg 3 times daily for 2 weeks, no side effects were reported in their breastfed infants.[4]

In a study comparing sulpiride to placebo for enhancement of milk production, infant weight gain was greater in the infants of treated women up to day 15, but there was no difference in weight gain between the groups thereafter.[9]

### Effects on Lactation and Breastmilk

Sulpiride increases serum prolactin and may cause galactorrhea at a higher rate than other psychotropic drugs.[10-15] The levo- isomer, levosulpiride, which is available abroad, has also caused hyperprolactinemia and galactorrhea.[16]

Several studies have been published on the use of sulpiride in enhancing milk supply.[4,5,7,9,10,17,18] Most of the studies have serious design flaws. Although these studies were all placebo controlled, only 3 studies were blinded and randomized.

In one study, 28 women were randomized to sulpiride 50 mg (n = 14) or placebo (n = 14) 3 times daily for 4 weeks. Women were within 4 months postpartum and had identified themselves as having insufficient milk. The two groups were fairly well matched at the initiation of the trial, except that mothers in the placebo group had been supplementing for longer than women in the sulpiride group, 33 and 22 days, respectively. Mothers in both groups fed their infants an average of 5.3 times daily. Mothers were given no instruction on breastfeeding technique. Serum prolactin rose in sulpiride-treated patients to about 400 mcg/L and fell slightly in placebo-treated patients. However, neither milk yields at the beginning of the study nor increases in yield showed any relationship to increases in serum prolactin. Infant weight gain was greater in the treated patients at the end of the study (1081 vs 795 grams); however, most of the infants in both groups were given supplementary feedings, so it is impossible to tell if the weight gain in the sulpiride group was caused by increased milk production or by the supplementation.[5]

A study of 66 primiparous mothers with normal infants who expressed a desire to breastfeed received sulpiride 100 mg 3 times daily for the first 4 days postpartum, then 50 mg 3 times daily for the next 86 days. Mothers who received sulpiride maintained elevated baseline serum prolactin levels of 117 to 119 mcg/L throughout the 90-day study period. Mothers taking placebo had a normal drop in serum prolactin from 113 mcg/L on day 1 to 20 mcg/L on day 90; however, on days 4, 15 and 30, their 30-minute postsuckling prolactin levels reached about the same levels as the sulpiride-treated mothers because they had very small increases in prolactin after nursing. At days 60 and 90, women taking placebo had much lower baseline and postsuckling prolactin levels than treated women. Infant weight gain was greater in the infants of treated women up to day 15, but there was no difference between the groups thereafter.[9] This study suffered from a high 38% dropout rate, which makes intent-to-treat analysis unfeasible.

A randomized, double-blind trial studied 60 women who were 25 to 40 days postpartum, 40 with insufficient lactation averaging 293 mL daily and 20 with no milk production at the start of the study. No mention was made of any lactation education given to the subjects before or during the study or the frequency of nursing during the study. Subjects were given l-sulpiride, d-sulpiride or d,l-sulpiride 50 mg twice daily or placebo for 15 days. Milk production increased in all drug groups. All women with insufficient lactation, including those receiving placebo, could avoid supplementation after 6 days of therapy. Women with no milk production at the start who received a drug were able to stop supplementation after 10 to 15 days; those in the placebo group were not able to breastfeed at the end of the study. The authors state that the increased milk production declined progressively after drug discontinuation, but did not provide any data.[10]

### Alternate Drugs to Consider

(Galactogogue) Domperidone, Metoclopramide

### References

1 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307-14.29902083
2 Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol 2021;137:e42-e53.33481531
3 Moreland TA, Donnet ML, McEwen J, . Sulpiride excretion in lactating mothers. Eur J Clin Pharmacol 1989;36 (Suppl):A153. doi:10.1007/BF02411402
4 Ylikorkala O, Kauppila A, Kivinen S, . Treatment of inadequate lactation with oral sulpiride and buccal oxytocin. Obstet Gynecol 1984;63:57-60.6361642
5 Ylikorkala O, Kauppila A, Kivinen S, . Sulpiride improves inadequate lactation. Br Med J (Clin Res Ed) 1982;285:249-51.
6 Badraoui MH, Hefnawi F, Hegab M, . The effect of a nonhormonal drug used as a contraceptive method and lactation stimulant after delivery. Fertil Steril 1978;30:742. https://www.fertstert.org/article/S0015-0282(16)58841-4/fulltext
7 Aono T, Shioji T, Aki T, . Augmentation of puerperal lactation by oral administration of sulpiride. J Clin Endocrinol Metab 1979;48:478-82.429499
8 Saito J, Tachibana Y, Wada YS, . Transfer of brotizolam, periciazine, and sulpiride in cord blood and breast milk, and alprazolam in breast milk: A case report. J Pharm Health Care Sci 2022;8:10.35361275
9 Barguño JM, del Pozo E, Cruz M, . Failure of maintained hyperprolactinemia to improve lactational performance in late puerperium. J Clin Endocrinol Metab 1988;66:876-9.3346364
10 Polatti F. Sulpiride isomers and milk secretion in puerperium. Clin Exp Obstet Gynecol 1982;9:144-7.6762263
11 McMurdo ME, Howie PW, Lewis M, . Prolactin response to low dose sulpiride. Br J Clin Pharmacol 1987;24:133-7.3620290
12 Hanew K, Utsumi A, Sugawara A, . Simultaneous administration of TRH and sulpiride caused additive but not synergistic PRL rsesponses in normal subjects. Endocrinol Jpn 1992;39:465-8.1478187
13 Kropp S, Ziegenbein M, Grohmann R, . Galactorrhea due to psychotropic drugs. Pharmacopsychiatry 2004;37 (Suppl 1):S84-8.15052519
14 Lu ML, Shen WW, Chen CH. Time course of the changes in antipsychotic-induced hyperprolactinemia following the switch to aripiprazole. Prog Neuropsychopharmacol Biol Psychiatry 2008;32:1978-81.18848860
15 Alghamdi A, Alsalmi T, Alzahrani S, . Sulpiride-induced severe hyperprolactinemia in an IBS Patient: A case report from Saudi Arabia. AACE Endocrinol Diabetes 2026;13:630-2.42491902
16 Mahto SK, Agarwal N, Gupta K, . A rare side effect of levosulpiride: Galactorrhea. Indian J Pharmacol 2021;53:76-7.33976003
17 Polatti F, Brambilla A, Mandelli B, . Can pharmacologic hyperprolactinemia and breast-suction induce lactation in women with normal menstrual cycles? Clin Exp Obstet Gynecol 1984;11:123-5.6499184
18 Aono T, Aki T, Koike K, . Effect of sulpiride on poor puerperal lactation. Am J Obstet Gynecol 1982;143:927-32.7102768

## Substance Identification

### Substance Name

Sulpiride

### CAS Registry Number

15676-16-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antipsychotic Agents

Dopamine Antagonists